# Ioxaglate

CASRN: 59017-64-0

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous iodinated contrast media are poorly excreted into breastmilk and poorly absorbed orally so they are not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4] However, because there is no published experience with ioxaglate during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate, Iohexol

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. (2005). The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol.
2 Chen MM, Coakley FV, Kaimal A, et al. (2008). Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol.
3 Copel J, El-Sayed Y, Heine RP, et al. (2017). Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol.
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2022;Version 2022:106-7. https://www.acr.org/Clinical-Resources/Contrast-Manual

## Substance Identification

### Substance Name

Ioxaglate

### CAS Registry Number

59017-64-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents